# Tolmetin

CASRN: 26171-23-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of tolmetin in breastmilk and its short half-life, it is unlikely to adversely affect the breastfed infant. However, because there is no published experience with breastfeeding during tolmetin use, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Following a single 400 mg dose of tolmetin in a woman who was 2 months postpartum, peak milk levels occurred at 40 and 60 minutes after the dose in the right and left breasts, respectively, and averaged 160 mcg/L. The drug was undetectable (<30 mcg/L) in milk by 5 hours after the dose and its half-life in breastmilk was 1.54 hours.[1]

Using the peak milk level data, the estimated maximum intake of an exclusively breastfed infant would be 0.4% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Sagraves R, Waller ES, Goehrs HR. Tolmetin in breast milk. Drug Intell Clin Pharm 1985;19:55–6.3967576

## Substance Identification

### Substance Name

Tolmetin

### CAS Registry Number

26171-23-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal